# Zileuton

CASRN: 111406-87-2

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the use of zileuton during breastfeeding; however, manufacturer's data indicate that the dose in milk is low. An expert guideline considers that leukotriene receptor antagonists can be used during breastfeeding.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Beclomethasone, Cromolyn, Montelukast, Terbutaline, Theophylline

### References

1 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62 38513758

## Substance Identification

### Substance Name

Zileuton

### CAS Registry Number

111406-87-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Leukotriene Antagonists

Lipoxygenase Inhibitors